# Fentanyl

CASRN: 437-38-7

## Drug Levels and Effects

### Summary of Use during Lactation

When used epidurally or intravenously during labor or for a short time immediately postpartum, amounts of fentanyl ingested by the neonate are usually small and are not expected to cause any adverse effects in breastfed infants. Preterm infants are the most susceptible to fentanyl’s effects because their clearance is substantially reduced.[1] The results of studies on the effect of epidural fentanyl on breastfeeding initiation and duration are mixed, because of the many different combinations of drugs, dosages and patient populations studied as well as the variety of techniques used and deficient designs of many of the studies. It has been suggested that a cumulative dose of 80 to 150 mcg of fentanyl during labor and delivery reduces breastfeeding success,[2-4] but another study found no marked decrease in breastfeeding success with doses above 150 mcg in motivated women with previous breastfeeding success.[5] In infants placed skin-to-skin after a normal vaginal delivery, epidural fentanyl given during labor may delay the infant’s first suckling in a dose-dependent manner,[6] perhaps because it can persist in the infant’s serum for over 24 hours after discontinuation.[7] However, it appears that with good breastfeeding support, epidural fentanyl plus bupivacaine has little overall effect on breastfeeding success.[8-12]

No waiting period or discarding of milk is required before resuming breastfeeding after fentanyl is used for short procedures (e.g., for endoscopy).[13,14] After general anesthesia, breastfeeding can be resumed as soon as the mother has recovered sufficiently from anesthesia to nurse. When a combination of anesthetic agents is used for a procedure, follow the recommendations for the most problematic medication used during the procedure. Limited information indicates that transdermal fentanyl in a dosage of 100 mcg/hour results in undetectable fentanyl concentrations in breastmilk.

Mothers with opioid use disorder who are using fentanyl have lower breastfeeding initiation rates than other mothers with opioid use disorder.[15] Breastfeeding 72 hours after the birthing parent’s last use of nonprescribed fentanyl has been used along with treatment for substance use disorder, newborn care and observation, and ongoing social and medical support.[16]

### Drug Levels

Plasma fentanyl levels of 0.2 to 1.2 mcg/L are required for analgesia via the nonepidural route and plasma levels over 1 to 2 mcg/L may cause respiratory depression. Plasma levels are markedly lower when the epidural route is used. The oral bioavailability of fentanyl is 33% in adults. The usual intravenous of fentanyl for an infant is 1 to 2 mcg/kg. Fentanyl is metabolized to norfentanyl and inactive metabolites.

Maternal Levels. Eight women who had undergone cesarean section received fentanyl 100 mcg epidurally immediately after delivery. Fentanyl was undetectable (<0.1 mcg/L) in colostrum at about 1 hour after the dose.[17]

Thirteen women were given a single fentanyl 2 mcg/kg intravenous dose during either cesarean section or postpartum tubal ligation. Colostrum was collected at 0.75, 2, 4, 6, 8, and 10 hours after the dose. The average peak fentanyl level was 0.40 mcg/L and occurred 45 minutes after the dose. Average levels declined to 0.22 mcg/L at 2 hours and to 0.15 mcg/L at 4 hours then to the lower limit of the assay (0.05 mcg/L) at 6, 8, and 10 hours after the dose.[18] Based on the peak milk fentanyl level reported in this study, an exclusively breastfed infant would receive a fentanyl dose of 0.06 mcg/kg daily.

Ten women were given 50 to 100 mcg of intravenous fentanyl every hour during labor. Their breastmilk was sampled 4 and 24 hours after delivery. The cumulative maternal fentanyl dosages ranged from 50 to 400 mcg and the longest time from last dose to delivery was 3.1 hours (range 0 to 3.1 hours). Fentanyl was undetectable (<0.05 mcg/L) in the milk of 8 of the women 4 hours after delivery and in 2 of the women 24 hours after delivery. Detectable milk levels of fentanyl ranged from 0.12 to 0.15 mcg/L at 4 hours after delivery and from 0.12 to 0.14 mcg/L at 24 hours after delivery.[19] Based on the highest milk level reported in this study, an exclusively breastfed infant would receive a fentanyl dosage of 0.02 mcg/kg daily.

Five women who were 6 to 15 weeks postpartum were given a single dose of 100 mcg of fentanyl intravenously before undergoing general anesthesia. Several milk samples were collected between 5 and 24 hours after the injection from each woman. The authors estimated that the infants would receive an average of 0.005 mcg/kg in the 24 hours after a single dose of fentanyl. This corresponds to about 0.38 % of the maternal weight-adjusted dosage. The authors concluded that this amount of fentanyl in milk is unlikely to affect a healthy, term infant.[20] The infants of mothers not undergoing a surgical procedure might receive a greater dose of fentanyl in breastmilk, but it would be unlikely to be a large dose.

A randomized, prospective study measured colostrum fentanyl concentrations following epidural or intravenous fentanyl during delivery in 100 multiparous mothers undergoing cesarean section and delivering full-term, healthy infants. Epidural fentanyl was given to 50 women in a dose of 100 to 150 mcg in divided doses followed by a continuous epidural infusion of 20 mcg/hour. Intravenous fentanyl was given to 50 women as a single dose of 50 mcg after delivery. Both groups received epidural or spinal bupivacaine in addition. Colostrum samples were obtained 45 minutes and 24 hours after the initial fentanyl dose. At 45 minutes, colostrum fentanyl concentrations were 0.4 mcg/L in the epidural group and 0.19 mcg/L in the intravenous group. At 24 hours, colostrum fentanyl concentrations were 80 ng/L in the epidural group and 0.05 mcg/L in the intravenous group. The authors estimated that in the worst-case scenario, a fully breastfed infant would absorb a fentanyl dose of 0.016 mcg/kg.[21]

A woman was using a transdermal fentanyl patch for chronic back pain during pregnancy and postpartum. The mother required additional analgesia during labor and the infant required treatment for neonatal abstinence syndrome. By 2 weeks postpartum, the mother was using a fentanyl patch in a dosage of 100 mcg/hour which was changed every other day. A sample of pumped breastmilk from one breast contained fentanyl 6.4 mcg/L and norfentanyl 6.2 mcg/L.[22]

Infant Levels. An infant whose mother was using a fentanyl patch in a dosage of 100 mcg/hour which was changed every other day was fed her mother’s milk either by bottle or by the breast every 3 hours beginning about 2 weeks postpartum. On day 27 of life, the infant was fed 380 mL of maternal milk following several feedings during the prior 24 hours. The infant’s serum fentanyl and norfentanyl concentrations were not detectable (<0.1 mcg/L).[22]

### Effects in Breastfed Infants

Fentanyl was possibly the cause of statistically significant, but clinically unimportant, lower neurobehavioral scores in a group of 32 newborns who were less than 24 hours old and whose mothers had received epidural fentanyl during labor.[23]

An epidural fentanyl dosage greater than 150 mcg during labor was associated with slightly lower neurobehavioral scores in the newborns of 177 breastfeeding mothers on postpartum day 1 compared to a lower total dosage or to no fentanyl;[2] however, this might have been a chance association[24] and was probably due to placental transfer of fentanyl prior to delivery and not from breastmilk after delivery. All women also received epidural bupivacaine.

A woman was using a transdermal fentanyl patch for chronic back pain during pregnancy and postpartum. The mother required additional analgesia during labor and the infant required treatment for neonatal abstinence syndrome. By 2 weeks postpartum, the mother was using a fentanyl patch in a dosage of 100 mcg/hour which was changed every other day, and the infant was being fed the mother’s milk every 3 hours. The infant had no additional medical problems and fed well until discharge after day 27 of life, gaining 500 grams.[22]

A search was performed of the shared database of all U.S. poison control centers for the time period of 2001 to 2017 for calls regarding medications and breastfeeding. Of 2319 calls in which an infant was exposed to a substance via breastmilk, 7 were classified as resulting in a major adverse effect, and one of these involved fentanyl. A one-month-old infant was exposed to fentanyl, morphine, oxycodone, and unspecified benzodiazepines. The infant was admitted to the intensive care unit and described as being agitated and irritable and having tachycardia, confusion, drowsiness, lethargy, miosis, respiratory depression, acidosis, and hyperglycemia. The dosages, routes of administration, and extent of breastfeeding were not reported and the infant survived.[25]

### Effects on Lactation and Breastmilk

Fentanyl can increase serum prolactin.[26,27] However, the prolactin level in a mother with established lactation may not affect her ability to breastfeed.

Five women who were 6 to 15 weeks postpartum were given single doses of 100 mcg of fentanyl, 2 mg of midazolam and 2.5 mg/kg of propofol intravenously before undergoing general anesthesia. The women’s milk output following the surgical procedure was less than half of the normal milk output of nursing mothers. The authors speculated that milk volume might be reduced postoperatively because of perioperative fluid restriction and volume losses, as well as stress-induced inhibition of milk production.[20]

In 58 breastfeeding mothers who received an epidural fentanyl dosage greater than 150 mcg during labor, 21% reported more difficulty in establishing breastfeeding at 24 hours after delivery compared to 10% of mothers who received to a lower dosage or to no fentanyl. There was no difference in breastfeeding difficulty noted between the groups 24 hours after delivery as determined by a lactation consultant. Women in the high-dose group who could be contacted were more likely to discontinue breastfeeding by 6 weeks after delivery and there was a higher rate of breastfeeding discontinuation at 6 weeks among mothers who reported breastfeeding difficulty 24 hours after delivery.[2] A relatively high dropout rate from the study at 6 weeks clouds the results.[24]

A retrospective study of a random sample of 425 mothers delivering in a maternity unit found a dose-related increased risk of bottle feeding at hospital discharge associated with fentanyl administered during labor.[28]

A prospective cohort study compared women who received continuous epidural analgesia with fentanyl and either bupivacaine or ropivacaine during labor and delivery (n = 52) to women who received no analgesia (n = 63). The average total fentanyl dosage was 124 mcg and the average total infusion time from start to delivery was 219 minutes. The study found no differences between the groups in breastfeeding effectiveness or infant neurobehavioral status at 8 to 12 hours postpartum or the number exclusively or partially breastfeeding at 4 weeks postpartum.[29]

A randomized, prospective study measured infant breastfeeding behavior following epidural or intravenous fentanyl during delivery in 100 multiparous mothers undergoing cesarean section and delivering full term, healthy infants. Epidural fentanyl was given to 50 women in a dose of 100 to 150 mcg in divided doses followed by a continuous epidural infusion of 20 mcg/hour. Intravenous fentanyl was given to 50 women as a single dose of 50 mcg after delivery. Both groups received epidural or spinal bupivacaine in addition. A slight difference was seen in breastfeeding behavior between the groups, with the infants in the intravenous fentanyl group performing slightly worse than those in the epidural group. However, all mothers were able to breastfeed their infants at 24 hours. None had severe breastfeeding problems; 10 women in the epidural group reported mild or moderate problems and 7 women in the intravenous group reported breastfeeding problems. Twenty mothers in the epidural group and 14 in the intravenous group used supplemental bottle feeding, with the difference not statistically significant.[21]

A randomized, multicenter trial compared the initiation rate and duration of breastfeeding in women who received high-dose epidural bupivacaine alone, or one of two low-dose combinations of bupivacaine plus fentanyl. The average fentanyl dosages in the two groups were 97 and 151 mcg in the first stage of labor and 10 and 12 mcg of fentanyl during the second stage of labor, respectively, with great variability. A nonepidural matched control group was also compared. No differences in breastfeeding initiation rates or duration were found among the epidural and nonmedicated groups, but women in the nonepidural group who received systemic meperidine had a lower breastfeeding initiation rate than in the other groups.[30]

A nonrandomized study in low-risk mother-infant pairs found that there was no difference overall in the amount of sucking by newborns, whether their mothers received bupivacaine plus fentanyl, or fentanyl alone by epidural infusion in various dosages, or received no analgesia for childbirth. In a subanalysis by sex and number of sucks, female infants were affected by high-dose bupivacaine and high-dose fentanyl, but male infant were not.[31] However, the imbalances of many factors between the study groups makes this study difficult to interpret.

In a prospective cohort study, 87 multiparous women who received epidural bupivacaine and fentanyl for pain control during labor and vaginal delivery. A loading dose of 0.125% bupivacaine with fentanyl 50-100 mcg. Epidural analgesia is maintained using 0.0625% bupivacaine and fentanyl 0.2 mcg/mL. The median dose of fentanyl received by the women was 151 mcg (range 30 to 570 mcg). The women completed questionnaires at 1 and 6 weeks postpartum regarding breastfeeding. Most women had prior experience with breastfeeding, support at home and ample time off from work. All women were breastfeeding at 1 week postpartum and 95.4% of women were breastfeeding at 6 weeks postpartum.[32]

A nonrandomized study at one Italian hospital compared primiparous mothers undergoing vaginal delivery who received epidural analgesia (n = 64) to those who did not (n = 64). Mothers who requested the epidural analgesia received an initial dose of 100 mcg of fentanyl diluted to 10 mL with saline. After the initial fentanyl, doses of 15 to 20 mL of 0.1% ropivacaine were administered if needed. The only difference between the groups of mothers was a longer duration of labor among the treated mothers. The quality of infant nursing was equal between the 2 groups of infants on several measures; however, more infants in the treated group breastfed for less than 30 minutes at the first feeding.[33]

A national survey of women and their infants from late pregnancy through 12 months postpartum compared the time of lactogenesis II in mothers who did and did not receive pain medication during labor. Categories of medication were spinal or epidural only, spinal or epidural plus another medication, and other pain medication only. Women who received medications from any of the categories had about twice the risk of having delayed lactogenesis II (>72 hours) compared to women who received no labor pain medication.[34]

A randomized study compared the effects of cesarean section using general anesthesia, spinal anesthesia, or epidural anesthesia, to normal vaginal delivery on serum prolactin and oxytocin as well as time to initiation of lactation. General anesthesia was performed using propofol 2 mg/kg and rocuronium 0.6 mg/kg for induction, followed by sevoflurane and rocuronium 0.15 mg/kg as needed. After delivery, patients in all groups received an infusion of oxytocin 30 international units in 1 L of saline, and 0.2 mg of methylergonovine if they were not hypertensive. Fentanyl 1 to 1.5 mcg/kg was administered after delivery to the general anesthesia group. Patients in the general anesthesia group (n = 21) had higher post-procedure prolactin levels and a longer mean time to lactation initiation (25 hours) than in the other groups (10.8 to 11.8 hours). Postpartum oxytocin levels in the nonmedicated vaginal delivery group were higher than in the general and spinal anesthesia groups.[35]

A randomized, nonblinded study compared the use of intramuscular meperidine 100 mg to intranasal (mean dose 486 mcg) or subcutaneous (mean dose 300 mcg) fentanyl for labor analgesia. More women in the meperidine group had difficulty establishing lactation (79%) than in the intranasal (39%) or subcutaneous (44%) fentanyl groups. Mothers who received meperidine reported more sedation, had longer labors, and their infants were more likely to be admitted to the nursery.[36,37]

A retrospective study in a Spanish public hospital compared the infants of mothers who received an epidural during labor that contained fentanyl and either bupivacaine or ropivacaine. Infants of mothers who received an epidural had a lower frequency of early breastfeeding.[38]

A small prospective study in California compared women who received an epidural infusion of fentanyl and ropivacaine to mothers who did not receive an epidermal during labor. All mothers had normal vaginal deliveries, and their infants had 1 uninterrupted hour of skin-to-skin contact immediately postpartum. The study found inverse relationships between the amount of fentanyl and the amount of oxytocin received during labor and the time of the first suckling. Because women who received more fentanyl also tended to receive more oxytocin, the study could not clearly separate the effects of the two drugs.[6]

A randomized, double-blind study compared three epidural maintenance solutions for labor analgesia in women receiving epidural analgesia during labor: bupivacaine 1 mg/mL, bupivacaine 0.8 mg/mL with fentanyl 1 mcg/mL, or bupivacaine 0.625 mg/mL with fentanyl 2 mcg/mL. At 6 weeks postpartum, the breastfeeding rate was 94% or greater in all groups, with no difference among them. All mothers delivered full-term infants and were highly motivated to breastfeed and almost all had vaginal deliveries.[5]

A prospective cohort study in 1204 Israeli women on the effect of labor epidural analgesia during labor, the following protocol was used: bupivacaine 0.1% 15 mL and fentanyl 100 mcg in 5-mL increments, followed by an epidural infusion of bupivacaine 0.1% 10 mL and fentanyl 2 mcg/mL, with a patient-controlled epidural analgesia modality with 5 mL bolus with a lock-out time of 15 minutes. At 6 weeks postpartum, the breastfeeding and exclusive breastfeeding rates were lower (74% and 52%, respectively) in mothers who received the epidural analgesia than in those who did not (83% and 68%, respectively). However, the difference was mostly accounted for by parity, with the intervention having little effect on multiparous women.[39]

A prospective study in an Australian hospital compared mothers who received epidural fentanyl analgesia, subcutaneous morphine or neither during labor and delivery. When controlled for labor induction, instrumental delivery and special care nursery admission, no difference was seen between the 3 groups in breastfeeding rates at discharge or at 6 weeks postpartum.[40]

A randomized, partially blinded study in a hospital in Thailand compared intravenous meperidine and fentanyl for pain during active labor. Mothers received either meperidine 50 mg (n = 46) or fentanyl 50 mcg (n = 46) initially and then every 1 (fentanyl) or 2 (meperidine) hours as requested by the mother. The percentages of infants who breastfed in the first 24 hours were only 61% for meperidine and 54% for fentanyl, although the difference was not statistically significant. Care of the infants (e.g., skin-to-skin in the first hour) was not reported.[41]

A multicenter, prospective cohort study in Hong Kong of 1277 women who gave birth found that women who received epidural analgesia with either fentanyl or morphine had no decreased frequency of breastfeeding in the first hour compared to mothers who did not receive epidural analgesia. All epidural injections were combined with a local anesthetic, but the exact dosages were not given.[42]

A prospective, observational study in Norway found that infant spontaneous suckling was negatively associated with any intrapartum fentanyl use. The odds of non-exclusive breastfeeding were doubled with epidural fentanyl analgesia and were 4 times higher with intravenous plus epidural fentanyl compared to no opioid exposure. Compared to higher doses, intravenous fentanyl doses greater than 200 mcg resulted in a reduction in exclusive breastfeeding and spontaneous suckling, and an increase in breastfeeding problems.[3]

A nonrandomized, nonblinded study in a Serbian hospital of women near term who underwent cesarean section compared general anesthesia (n = 284) to spinal or epidural anesthesia (n = 249). Spinal anesthesia consisted of hyperbaric bupivacaine 12 mg and fentanyl 0.01 mg; epidural anesthesia consisted of isobaric bupivacaine 0.5% (0.5 mg per 10 cm height) and fentanyl 0.05 mg. General anesthesia consisted of propofol 2.3 mg/kg and succinylcholine 1.5 mg/kg for induction and intubation, followed by an anesthetic gas mixture and oxygen. Reportedly, nitric oxide (possibly nitrous oxide) was 50% of the gas before delivery and 67% after delivery. Sevoflurane was also used in some cases. After delivery and cord clamping, mothers received fentanyl 3 mcg/kg and rocuronium 0.5 mg/kg intravenously for placental delivery. After surgery, neuromuscular block reversal was performed with neostigmine and atropine. All patients received 1 mg/kg of diclofenac every 8 h for 24 hours after delivery and 98% of general anesthesia patients also received 100 mg of tramadol and 78.5% received acetaminophen 1 gram. No regional anesthesia patients received tramadol or acetaminophen. Patients receiving one of the regional anesthetic protocols established lactation sooner (56% and 29% after 18 and 24 hours, respectively), while 86% of women receiving general anesthesia did not establish lactation until 36 to 48 hours after surgery.[43]

In a study of primiparous women with an uncomplicated pregnancy, some women received epidural analgesia with ropivacaine (dose not specified) and fentanyl in a median dose of 121 mcg (IQR 77 to 192 mcg), some received oxytocin alone and other received neither. Breastfeeding outcomes in the three groups were compared at 3 days, 1 month and 4 months postpartum. The study found no relationship between low-dose oxytocin use and breastfeeding success, but that epidermal analgesia lowered milk supply at 3 days and 1 month postpartum, and decreased rates of breastfeeding at 4 months postpartum.[4]

A randomized, double-blind study compared the outcomes of women who received either 25 or 50 mcg of fentanyl intravenously for labor pain relief. Doses could be repeated hourly as requested by the patient. The average total dosages of fentanyl were 32.8 mcg and 60.2 mcg, respectively. No differences was observed in breastfeeding difficulty, defined as difficulty establishing feeding within 2 hours.[44]

### Alternate Drugs to Consider

Acetaminophen, Butorphanol, Hydromorphone, Ibuprofen, Morphine

### References

1 Wu Y, Völler S, Flint RB, . Pre- and postnatal maturation are important for fentanyl exposure in preterm and term newborns: A pooled population pharmacokinetic study. Clin Pharmacokinet 2022;61:401-12.34773609
2 Beilin Y, Bodian CA, Weiser J, . Effect of labor epidural analgesia with and without fentanyl on infant breast-feeding: A prospective, randomized, double-blind study. Anesthesiology 2005;103:1211-7.16306734
3 Oommen H, Oddbjørn Tveit T, Eskedal LT, . The association between intrapartum opioid fentanyl and early breastfeeding: A prospective observational study. Acta Obstet Gynecol Scand 2021;100:2294-302.34622936
4 Takahata K, Horiuchi S, Miyauchi A, . A longitudinal study of the association of epidural anesthesia and low-dose synthetic oxytocin regimens with breast milk supply and breastfeeding rates. Sci Rep 2023;13:21146.38036700
5 Lee AI, McCarthy RJ, Toledo P, . Epidural labor analgesia-fentanyl dose and breastfeeding success: A randomized clinical trial. Anesthesiology 2017;127:614-24.28926440
6 Brimdyr K, Cadwell K, Widstrom AM, . The association between common labor drugs and suckling when skin-to-skin during the first hour after birth. Birth 2015;42:319-28.26463582
7 Moore A, El-Bahrawy A, Hatzakorzian R, . Maternal epidural fentanyl administered for labor analgesia is found in neonatal urine 24 hours after birth. Breastfeed Med 2016;11:40-1.26701799
8 Reynolds F. Labour analgesia and the baby: Good news is no news. Int J Obstet Anesth 2011;20:38-50.21146977
9 Loubert C, Hinova A, Fernando R. Update on modern neuraxial analgesia in labour: A review of the literature of the last 5 years. Anaesthesia 2011;66:191-212.21320088
10 Zuppa AA, Alighieri G, Riccardi R, . Epidural analgesia, neonatal care and breastfeeding. Ital J Pediatr 2014;40:82.25432659
11 French CA, Cong X, Chung KS. Labor epidural analgesia and breastfeeding: A systematic review. J Hum Lact 2016;32:507-20.27121239
12 Shrestha B, Devgan A, Sharma M. Effects of maternal epidural analgesia on the neonate-a prospective cohort study. Ital J Pediatr 2014;40:99.25492043
13 Shergill AK, Ben-Menachem T, Chandrasekhara V, . Guidelines for endoscopy in pregnant and lactating women. Gastrointest Endosc 2012;76:18-24.22579258
14 Vargo JJ, Delegge MH, Feld AD, . Multisociety sedation curriculum for gastrointestinal endoscopy. Gastroenterology 2012;143:e18-41.
15 Cooper B, Molho W, Wachman EM. Association of prenatal fentanyl exposure with neonatal opioid withdrawal syndrome severity. Hosp Pediatr 2026;16:460-5.42014095
16 Ostfeld-Johns S, Schiff D, Seidman D, . Safely supporting the establishment of breastfeeding in the setting of fentanyl use before the birth hospitalization. Obstet Gynecol 2026;148:323-31.41818755
17 Madej TH, Strunin L. Comparison of epidural fentanyl with sufentanil. Anaesthesia 1987;42:1156-61.2963561
18 Steer PL, Biddle CJ, Marley WS, . Concentration of fentanyl in colostrum after an analgesic dose. Can J Anaesth 1992;39:231-5.1551153
19 Leuschen MP, Wolf LJ, Rayburn WF. Fentanyl excretion in breast milk. Clin Pharm 1990;9:336-7.2350936
20 Nitsun M, Szokol JW, Saleh HJ, . Pharmacokinetics of midazolam, propofol, and fentanyl transfer to human breast milk. Clin Pharmacol Ther 2006;79:549-57.16765143
21 Goma HM, Said RN, El-Ela AM. Study of the newborn feeding behaviors and fentanyl concentration in colostrum after an analgesic dose of epidural and intravenous fentanyl in cesarean section. Saudi Med J 2008;29:678-82.18454213
22 Cohen RS. Fentanyl transdermal analgesia during pregnancy and lactation. J Hum Lact 2009;25:359-61.19286842
23 Ekwa-Ekoko C, Beilin Y, Abramowitz S, . Labor epidural fentanyl and new-born breast-feeding. Pediatr Res 2000;47 (4 Pt 2):187A. doi:10.1203/00006450-199904020-00727
24 Halpern SH, Ioscovich A. Epidural analgesia and breast-feeding. Anesthesiology 2005;103:1111-2.16306720
25 Beauchamp GA, Hendrickson RG, Horowitz BZ, . Exposures through breast milk: An analysis of exposure and information calls to U.S. poison centers, 2001-2017. Breastfeed Med 2019;14:508-12.31211594
26 Naito Y, Tamai S, Fukata J, . Comparison of endocrinological stress response associated with transvaginal ultrasound-guided oocyte pick-up under halothane anaesthesia and neuroleptanaesthesia. Can J Anaesth 1989;36:633-6.2555076
27 Frecska E, Perenyi A, Arato M. Blunted prolactin response to fentanyl in depression. Normalizing effect of partial sleep deprivation. Psychiatry Res 2003;118:155-64.12798980
28 Jordan S, Emery S, Bradshaw C, . The impact of intrapartum analgesia on infant feeding. BJOG 2005;112:927-34.15957994
29 Chang ZM, Heaman MI. Epidural analgesia during labor and delivery: Effects on the initiation and continuation of effective breastfeeding. J Hum Lact 2005;21:305-14.16113019
30 Wilson MJ, Macarthur C, Cooper GM, . Epidural analgesia and breastfeeding: A randomised controlled trial of epidural techniques with and without fentanyl and a non-epidural comparison group. Anaesthesia 2010;65:145-53.19912160
31 Bell AF, White-Traut R, Medoff-Cooper B. Neonatal neurobehavioral organization after exposure to maternal epidural analgesia in labor. J Obstet Gynecol Neonatal Nurs 2010;39:178-90.
32 Wieczorek PM, Guest S, Balki M, . Breastfeeding success rate after vaginal delivery can be high despite the use of epidural fentanyl: An observational cohort study. Int J Obstet Anesth 2010;19:273-7.20627690
33 Gizzo S, Di Gangi S, Saccardi C, . Epidural analgesia during labor: Impact on delivery outcome, neonatal well-being, and early breastfeeding. Breastfeed Med 2012;7:262-8.22166068
34 Lind JN, Perrine CG, Li R. Relationship between use of labor pain medications and delayed onset of lactation. J Hum Lact 2014;30:167-73.24451212
35 Kutlucan L, Seker IS, Demiraran Y, . Effects of different anesthesia protocols on lactation in the postpartum period. J Turk Ger Gynecol Assoc 2014;15:233-8.25584032
36 Fleet J, Belan I, Jones MJ, . A comparison of fentanyl with pethidine for pain relief during childbirth: A randomised controlled trial. BJOG 2015;122:983-92.25558983
37 Fleet JA, Jones M, Belan I. The influence of intrapartum opioid use on breastfeeding experience at 6 weeks post partum: A secondary analysis. Midwifery 2017;50:106-9.28411530
38 Herrera-Gómez A, García-Martínez O, Ramos-Torrecillas J, . Retrospective study of the association between epidural analgesia during labour and complications for the newborn. Midwifery 2015;31:613-6.25819707
39 Orbach-Zinger S, Landau R, Davis A, . The effect of labor epidural analgesia on breastfeeding outcomes: A prospective observational cohort study in a mixed-parity cohort. Anesth Analg 2019;129:784-91.31425221
40 Mahomed K, Wild K, Brown C, . Does fentanyl epidural analgesia affect breastfeeding: A prospective cohort study. Aust N Z J Obstet Gynaecol 2019;59:819-24.30957895
41 Raksakulkiat S, Punpuckdeekoon P. A comparison of meperidine and fentanyl for labor pain reduction in Phramongkutklao hospital. J Med Assoc Thai 2019;102:197-202. http://www.jmatonline.com
42 Fan HSL, Wong JYH, Fong DYT, . Association between intrapartum factors and the time to breastfeeding initiation. Breastfeed Med 2020;15:394-400.32283038
43 Stanisic DM, Kalezic N, Rakic A, . Comparison of post-cesarean pain perception of general versus regional anesthesia, a single-center study. Medicina (Kaunas) 2022;59:44.36676668
44 Srinil V, Inphum P, Srinil S. Comparison of two low-dose regimens of intravenous fentanyl for pain relief during labor: A double-blind randomized controlled trial. Healthcare (Basel) 2025;13:2236.40941588

## Substance Identification

### Substance Name

Fentanyl

### CAS Registry Number

437-38-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesics, Opioid

Narcotics

Anesthetics, Intravenous

Opiates